# Alendronate

CASRN: 66376-36-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited evidence indicates that breastfeeding after cessation of long-term bisphosphonate treatment appears to have no adverse effects on the infant. Because no information is available on the use of alendronate during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. However, absorption of alendronate by a breastfed infant is unlikely. If the mother receives a bisphosphonate during pregnancy or nursing, some experts recommend monitoring the infant's serum calcium during the first 2 months postpartum.[1]

### Drug Levels

Alendronate is poorly absorbed orally (average in adults 1% on an empty stomach, negligible with food and calcium), so absorption of alendronate by a breastfed infant is unlikely.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Because alendronate can persist in the body for years after long-term administration, the following cases may be relevant. A woman received alendronate for 6 months, then pamidronate every 4 months for 1 year prior to conception. Her infant was breastfed (extent not stated) for 3 months. The infant had mild hypocalcemia at 2 months of age, but a normal calcium level and normal long bone development at 5 months of age.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Pamidronate

### References

1 Stathopoulos IP, Liakou CG, Katsalira A, et al. (2011). The use of bisphosphonates in women prior to or during pregnancy and lactation. Hormones.
2 Hassen-Zrour S, Korbaa W, Bejia I, et al. (2010). Maternal and fetal outcome after long-term bisphosphonate exposure before conception. Osteoporos Int.

## Substance Identification

### Substance Name

Alendronate

### CAS Registry Number

66376-36-1

### Drug Class

Breast Feeding

Lactation

Bisphosphonates

Bone Density Conservation Agents

Diphosphonates